# Caffeine

CASRN: 58-08-2

## Drug Levels and Effects

### Summary of Use during Lactation

Caffeine appears in breastmilk rapidly after maternal ingestion. Insufficient high-quality data are available to make good evidence-based recommendations on safe maternal caffeine consumption.[1] Fussiness, jitteriness and poor sleep patterns have been reported in the infants of mothers with very high caffeine intakes equivalent to about 10 or more cups of coffee daily. Studies in mothers taking 5 cups of coffee daily found no stimulation in breastfed infants 3 weeks of age and older. A maternal intake limit of 300 to 500 mg daily might be a safe level of intake for most mothers, although European authorities set a likely safe level at 200 mg.[2-4] Maternal doses of caffeine greater than 130 mg daily may decrease weight gain in their exclusively breastfed infants, but this needs further confirmation.[5] However, preterm and younger newborn infants metabolize caffeine very slowly and may have serum levels of caffeine and other active caffeine metabolites similar to their mothers' levels, so a lower intake level preferable in the mothers of these infants.[2,6,7] Coffee is thought to decrease milk supply in some cultures, but there is no scientific information on coffee and milk supply.[8] Other sources of caffeine, such as cola and energy drinks, yerba mate or guarana, will have similar dose-related effects on the breastfed infant. Coffee intake of more than 450 mL daily may decrease breastmilk iron concentrations and result in mild iron deficiency anemia in some breastfed infants.[9]

### Drug Levels

The half-life of caffeine in late pregnancy is much longer than in nonpregnant women; however, the maternal half-life returns to normal within the first week postpartum.[10] Smokers have more rapid clearance of caffeine and shorter half-lives than nonsmokers because smoking induces CYP1A2. Caffeine clearance is very low in preterm and newborn infants, but reaches adult values by 3 to 5 months of age.[6]

Maternal Levels. Caffeine appears in breastmilk with a peak usually occurring about 1 hour after a dose.[11-13] Most studies did not measure active metabolites in milk.

Five women who were 4 months to 1 year postpartum were given a dose of 150 mg of caffeine orally as caffeine sodium benzoate solution 2 hours after breakfast. Average caffeine levels at 30, 60 and 120 minutes after the dose were 1.6, 1.5, and 0.9 mg/L, respectively. One woman also received a 300 mg dose on a separate occasion and her milk caffeine levels were about double those after her 150 mg dose.[14]

Two nursing mothers who were 7 and 13 weeks postpartum ingested tablets containing a total of 128 mg of caffeine. Milk samples were taken over 12 and 48 hours in the 2 women, respectively. Peak milk levels of 1.3 and 1.6 mg/L occurred at 1.5 and 2 hours, respectively.[12]

A mother who drank 3 cups of coffee over a 1-hour period and then coffee at will throughout the day had milk caffeine concentrations ranging from 0.32 to 1.15 mg/L in 8 milk samples taken over a 10.5 hour period.[15]

Fifteen women ingested a caffeine-containing beverage of their choice (coffee or tea) containing caffeine in amounts ranging from 35 to 336 mg. Their breastfed infants ranged from 2 weeks to 9 months of age. Eleven of the women had caffeine detectable in their breastmilk with peak levels ranging from 2.1 to 7.2 mg/L. The 4 mothers with undetectable caffeine (<0.2 mg/L) had ingested less than 100 mg of caffeine. The mean half-life of caffeine in milk was 6.1 hours.[11]

Nine nursing mothers ingested 750 mg of caffeine (5 doses of 150 mg) in instant coffee daily for 5 days. Pooled 24-hour milk samples were collected on days 5 and 9 after no caffeine had been taken for 4 days. Caffeine concentration in the mothers' milk averaged 4.3 mg/L, ranging from undetectable (<0.25 mg/L) to 28.6 mg/L. By day 9, caffeine was undetectable in all milk samples. The authors estimated that at this caffeine intake, infants would receive 0.6 to 0.8 mg/kg daily.[16]

Eleven nursing mothers randomly consumed 5 cups of decaffeinated coffee or 5 cups of decaffeinated coffee with a total of 500 mg of added caffeine daily for 5 days in a randomized, double- blinded study. Their infants averaged 47 days (range 22 to 71 days) of age. During a 24-hour collection period on day 5, milk of the women who consumed caffeine contained an average of 3.1 mg/L, which amounted to an average of 2.4 mg or 0.5 mg/kg daily intake for the infants.[3]

Six women who were 3.5 to 17 weeks postpartum were given a single oral tablet of caffeine containing 100 mg of caffeine. Ten breastmilk samples from each breast were collected over the next 24 hours. The average peak milk levels from both breasts was 2.5 mg/L at 1 hour after the dose. Caffeine concentrations in milk from both breasts fell with an average half-life of 7.2 hours.[13] Using milk AUC data from 5 of the women, an exclusively breastfed infant would receive about 10% of the weight-adjusted maternal dose.

Five nursing mothers who were 6 to 28 weeks postpartum received a single dose of 200 mg of caffeine as tablets. Blood and milk samples were taken over the next 24 hours for measurement of caffeine and 3 active caffeine metabolites, paraxanthine, theobromine, and theophylline. The peak caffeine levels in milk occurred at about 1 hour, but peak metabolite levels in milk occurred later at about 5 to 10 hours for paraxanthine and 10 to 15 hours for theobromine and theophylline. The authors estimated that an exclusively breastfed infant would receive a caffeine dose of 7% and a total xanthine dose of 18% of the maternal weight-adjusted dosage.[7]

After one mother consumed a cup of espresso containing 80 mg of caffeine, breastmilk caffeine concentration had a peak value of 2.05 ng/L two hours after the expresso. Caffeine was undetectable (< 0.01 ng/L) in breastmilk after 24 hours. The authors estimated that the woman's 2-month-old infant ingested 167 mL/kg of milk and 0.1 mg/kg of caffeine daily which was 8.9% of the mother's weight-adjusted dosage. The half-life of caffeine in breastmilk was 4 hours.[17]

Four mothers anonymously donated milk samples for analysis. Caffeine was found in their milk samples in concentrations of 33, 35, 988 and 1011 ng/gram of milk.[18]

A study of 100 women in Poland found a strong correlation between caffeine ingestion based on 3-day food frequency questionnaires and milk caffeine content. There was also a strong correlation between caffeine and its primary metabolite paraxanthine in milk. Theobromine, and to a lesser extent theophylline, were also found in milk. The highest amount of caffeine in milk was found in hindmilk after 4 weeks of lactation.[19]

Milk obtained from a mother 30 minutes after consuming 500 mL of Coca-Cola Zero contained 30 micromoles/L (5.8 mg/L) of caffeine.[20]

Infant Levels. Nine breastfed infants aged 14 days to 19 weeks of age had saliva caffeine levels measured after maternal ingestion of 1 cup of coffee. All but 2 were completely breastfed. Among the 7 fully breastfed infants, saliva caffeine levels ranged from 0.21 to 0.75 mg/L between 1 and 6 hours after the maternal ingestion of caffeine.[21]

Fifteen nursing mothers ingested a beverage containing caffeine in amounts ranging from 35 to 336 mg. Caffeine was not detected (<0.2 mg/L) in the urine of any of their infants over the 5-hour collection period that began 2 hours after the maternal caffeine intake.[11]

A 7-day-old breastfed infant's urine contained 1 mg/L of caffeine about 24 to 40 hours after his mother took a combination of butalbital 50 mg with acetaminophen 325 mg and caffeine 50 mg every 6 hours for 24 hours.[22]

### Effects in Breastfed Infants

Jitteriness in a 6-week-old breastfed infant reported by a mother who claimed to drink 4 to 5 cups of coffee and 2 to 3 bottles (about 480 mL each) of cola daily as well as occasional tea and cocoa. Upon examination, the infant was gaining weight appropriately, but had trembling and increased muscle tone. The infant's symptoms decreased markedly 2 weeks after his mother stopped all caffeine-containing beverages.[23]

Restlessness and irritability were reported in a breastfed (extent not stated) 5-month-old infant whose mother drank 20 cups of coffee a day.[15]

A physician who reported drinking at least 5 mugs of coffee, 4 mugs of tea and 1 can of cola daily breastfed 2 infants. The first slept for only brief periods and woke up easily. The second baby was fretful and jumpy and also had poor sleep patterns until his mother stopped her caffeine intake.[24]

Another physician who reportedly drank 1.7 to 2 liters of decaffeinated coffee daily had premature twins (age and extent of nursing not stated) who both seemed to be irritable, although the larger infant was partially supplemented with formula and seemed less affected. When her coffee consumption increased further, the smaller infant suffered convulsive-like episodes. All symptoms resolved 24 hours after coffee consumption ceased.[25]

Parents of a 24-day old infant reported restlessness and irritability in their breastfed infant whose mother reported drinking about 0.5 liters of mate every other day.[26]

Eleven nursing mothers randomly consumed 5 cups of decaffeinated coffee or 5 cups of decaffeinated coffee with 500 mg of added caffeine daily for 5 days in a randomized, double- blinded study. Their infants averaged 47 days (range 22 to 71 days) of age; the extent of nursing was not reported. At the end of each 5-day period, no effects of caffeine on sleep time and heart rate were found.[3]

A cohort study of mothers' caffeine intake and its effect on nighttime awakening asked mothers to provide their caffeine intake during pregnancy and lactation and their infant's sleep pattern infant at 3 months of age. Women who ingested more than 300 mg of caffeine daily reported slightly more nighttime awakenings in their infants than those who ingested less than 300 mg daily, but the difference was not statistically significant. The authors concluded that a limit of 300 mg of caffeine daily is reasonable.[27]

In a study of low-income nursing mothers in Costa Rica, subjects were divided into high-intake (over 450 mL daily) and nondrinkers of coffee. Infants of coffee drinkers had a lower birth weight, and decreased concentrations of maternal and infant hemoglobin and hematocrit at birth. Iron levels in breastmilk were also lower among coffee drinkers and their infants' hemoglobin and hematocrit values were lower at 1 month postpartum.[9]

A survey of 56 exclusively breastfeeding mothers found that caffeine consumption of up to 130 mg daily was related to increasing weight percentile (52.3%), while consumption of more than 130 mg daily was related to decreasing weight percentile (44.6%) of their infants. Length, head circumference and stool frequency were not influenced.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 McCreedy A, Bird S, Brown LJ, et al. Effects of maternal caffeine consumption on the breastfed child: A systematic review. Swiss Med Wkly 2018;148:w14665.30294771
2 James J, Lawrence R. Can consuming caffeine while breastfeeding harm your baby? An interview with Ruth Lawrence, PhD. J Caffeine Res 2011;1:192–4. doi:10.1089/caf.2011.1212
3 Ryu JE. Effect of maternal caffeine consumption on heart rate and sleep time of breast-fed infants. Dev Pharmacol Ther 1985;8:355–63.4075934
4 EFSA Panel on Dietetic Products Nutrition and Allergies (NDA). Scientific opinion on the safety of caffeine. EFSA J 2015;13:4102. doi:10.2903/j.efsa.2015.4102
5 Elenberg-Alter Y, Batcir R. Caffeine consumption influence among lactating mothers on babies' growth parameters during first 6 months of life -a prospective study. J Pediatr Gastroenterol Nutr 2023;76:1049–50. doi:10.1097/MPG.0000000000003823
6 McNamara PJ, Abbassi M. Neonatal exposure to drugs in breast milk. Pharm Res 2004;21:555–66.15139511
7 Oo CY, Burgio DE, Kuhn RC, et al. Pharmacokinetics of caffeine and its demethylated metabolites in lactation: Predictions of milk to serum concentration ratios. Pharm Res 1995;12:313–6.7784352
8 Eid AM, Jaradat N. Public knowledge, attitude, and practice on herbal remedies used during pregnancy and lactation in West Bank Palestine. Front Pharmacol 2020;11:46.32116721
9 Muñoz LM, Lönnerdal B, Keen CL, et al. Coffee consumption as a factor in iron deficiency anemia among pregnant women and their infants in Costa Rica. Am J Clin Nutr 1988;48:645–51.3414579
10 Knutti R, Rothweiler H, Schlatter CH. Effect of pregnancy on the pharmacokinetics of caffeine. Eur J Clin Pharmacol 1981;21:121–6.7341280
11 Berlin CM, Jr, Denson HM, Daniel CH, et al. Disposition of dietary caffeine in milk, saliva, and plasma of lactating women. Pediatrics 1984;73:59–63.6691042
12 Findlay JW, DeAngelis RL, Kearney MF, et al. Analgesic drugs in breast milk and plasma. Clin Pharmacol Ther 1981;29:625–33.7214793
13 Stavchansky S, Combs A, Sagraves R, et al. Pharmacokinetics of caffeine in breast milk and plasma after single oral administration of caffeine to lactating mothers. Biopharm Drug Dispos 1988;9:285–99.3395670
14 Tyrala EE, Dodson WE. Caffeine secretion into breast milk. Arch Dis Child 1979;54:787–9.507903
15 Bailey DN, Welbert RT, Naylor A. A study of salicylate and caffeine excretion in the breast milk of two nursing mothers. J Anal Toxicol 1982;6:64–8.7098450
16 Ryu JE. Caffeine in human milk and in serum of breast-fed infants. Dev Pharmacol Ther 1985;8:329–37.4075932
17 Calvaresi V, Escuder D, Minutillo A, et al. Transfer of nicotine, cotinine and caffeine into breast milk in a smoker mother consuming caffeinated drinks. J Anal Toxicol 2016;40:473–7.27129353
18 Musatadi M, Gonzalez-Gaya B, Irazola M, et al. Multi-target analysis and suspect screening of xenobiotics in milk by UHPLC-HRMS/MS. Separations 2021;8:14. doi:10.3390/separations8020014
19 Purkiewicz A, Pietrzak-Fiećko R, Sörgel F, et al. Caffeine, paraxanthine, theophylline, and theobromine content in human milk. Nutrients 2022;14:2196.35683994
20 Aschemacher NA, Gegenschatz SA, Teglia CM, et al. Highly sensitive and selective electrochemical sensor for simultaneous determination of gallic acid, theophylline and caffeine using poly(l-proline) decorated carbon nanotubes in biological and food samples. Talanta 2024;267:125246.37774452
21 Hildebrandt R, Gundert-Remy U. Lack of pharmacological active saliva levels of caffeine in breast-fed infants. Pediatr Pharmacol (New York) 1983;3:237–44.6677875
22 Vohra V, Marraffa JM. Maternal use of acetaminophen-butalbital-caffeine product resulting in neonate butalbital exposure through breast milk. Clin Toxicol 2019;57:549. doi:10.1080/15563650.2019.1598646
23 Rivera-Calimlim L. Drugs in breast milk. Drug Ther (NY) 1977;7:59–63.12336945
24 Clement MI. Caffeine and babies. Br Med J 1989;298:1461.
25 Rustin J. Caffeine and babies. Br Med J 1989;299:121.2504321
26 Martín I, López-Vilchez MA, Mur A, et al. Neonatal withdrawal syndrome after chronic maternal drinking of mate. Ther Drug Monit 2007;29:127–9.17304161
27 Santos IS, Matijasevich A, Domingues MR. Maternal caffeine consumption and infant nighttime waking: prospective cohort study. Pediatrics 2012;129:860–8.22473365

## Substance Identification

### Substance Name

Caffeine

### CAS Registry Number

58-08-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Central Nervous System Stimulants

Phosphodiesterase Inhibitors

Purinergic P1 Receptor Antagonists

Xanthines